# Tegaserod

CASRN: 145158-71-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tegaserod during breastfeeding. Because of the potential for serious adverse reactions in the breastfed infant, an alternate drug is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Linaclotide, Lubiprostone, Plecanatide, Prucalopride, Psyllium, Tenapanor

## Substance Identification

### Substance Name

Tegaserod

### CAS Registry Number

145158-71-0

### Drug Class

Breast Feeding

Lactation

Gastrointestinal Drugs

Serotonin Receptor Agonists